# Disopyramide

CASRN: 3737-09-5

## Drug Levels and Effects

### Summary of Use during Lactation

Disopyramide is sometimes found in the plasma of nursing infants at levels of 7.5% to 12.5% of the mother's levels. The N-monodesalkyldisopyramide (NMD) metabolite is more anticholinergic than disopyramide itself and appears in breastmilk in levels higher than disopyramide. However, of the cases reported, there are no reports of infant effects. Disopyramide may be used cautiously while breastfeeding when other alternatives are unacceptable. Observe the infant for anticholinergic symptoms. Infant serum concentrations can be monitored if there is any concern about drug-induced adverse effects. Theoretically, disopyramide might decrease the milk supply.

### Drug Levels

Maternal Levels. In one report, a maternal dose of 200 mg orally 3 times a day produced milk levels of 2.6 to 5.7 mg/L and N-monodesalkyldisopyramide (NMD) levels of 1.8 to 4.8 mg/L during the days 4 to 17 postpartum.[1]

A maternal disopyramide dose of 100 mg orally 5 times daily resulted in milk levels of 1.4 and 1.7 mg/L 3 hours after a dose on days 2 and 16 postpartum; metabolite levels were not measured.[2] The amounts in milk represent an infant dosage of about 2.5 to 3% of the maternal weight-adjusted dosage.

A mother taking 200 mg of disopyramide twice daily had milk levels of 0.58 mg/L before a dose and 0.98 mg/L at 3.5 hours after a dose.[3] The amounts in milk represent an infant dosage of about 1.3 to 2.2% of the maternal weight-adjusted dosage.

A woman taking 450 mg of disopyramide orally every 8 hours had milk levels of 2.6 to 4.4 mg/L at 0, 2, 4 and 8 hours after the dose, with the highest level reported 4 hours after the dose. Milk N-monodesalkyldisopyramide (NMD) levels ranged from 9.6 to 12.3 mg/L, with the highest level at 2 hours after the dose.[4] The peak disopyramide and NMD levels represent an infant dosage of about 3 and 8% of the maternal weight-adjusted dosages, respectively.

One mother (time postpartum not stated) took a single dose of disopyramide 100 mg orally. The highest milk level was 0.64 mg/L at 3 and 4 hours after the dose. By 12 hours after the dose, the milk level had fallen to 0.11 mg/L. The authors estimated that an exclusively breastfed infant would receive 3% of the maternal weight-adjusted dosage of disopyramide; however, metabolite levels were not measured.[5]

Infant Levels. A mother took disopyramide 200 mg orally 3 times a day. After 28 days of breastfeeding, the infant had a plasma disopyramide level of 0.5 mg/L (about 12.5% of maternal serum level) and no detectable NMD.[1]

The mother of a breastfed infant was taking a disopyramide dose of 100 mg orally 5 times daily. Disopyramide was undetectable (<0.5 mg/L) in the breastfed infant's plasma on days 2 and 16 of age.[2]

A mother was taking 200 mg of disopyramide twice daily. Her 8-week-old breastfed infant had serum disopyramide levels of 0.14 mcg/L before nursing and 0.1 mg/L at 1 and 2.5 hours after nursing. These were about 7.5% of maternal serum levels.[3]

A woman was taking 450 mg of disopyramide orally every 8 hours. Disopyramide was undetectable (<0.45 mg/L) in the infant's serum, but both disopyramide and NMD were detected in the infant's urine.[4]

### Effects in Breastfed Infants

There are reports of two infants who were breast-fed without complications during maternal disopyramide use of 500 to 600 mg daily effect.[1,2] Infant symptoms of crying and restlessness after meals thought by one mother to be caused by disopyramide in breastmilk were judged to be unrelated by the examining physicians.[3]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Barnett DB, Hudson SA, McBurney A. Disopyramide and its N-monodesalkyl metabolite in breast milk. Br J Clin Pharmacol 1982;14:310-2.7104189
2 MacKintosh D, Buchanan N. Excretion of disopyramide in human breast milk. Br J Clin Pharmacol 1985;19:856-7.4027131
3 Hoppu K, Neuvonen P, Korte T. Disopyramide and breast feeding. Br J Clin Pharmacol 1986;21:553.3718815
4 Ellsworth AJ, Horn JR, Raisys VA, et al. Disopyramide and N-monodesalkyl disopyramide in serum and breast milk. DICP Ann Pharmacother 1989;23:56-7.2718484
5 Wakaumi M, Tsuruoka S, Sakamoto K, et al. Pilsicainide in breast milk from a mother: Comparison with disopyramide and propafenone. Br J Clin Pharmacol 2005;59:120-2.15606453

## Substance Identification

### Substance Name

Disopyramide

### CAS Registry Number

3737-09-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiarrhythmics